# Deferoxamine

CASRN: 70-51-9

## Drug Levels and Effects

### Summary of Use during Lactation

Deferoxamine is poorly absorbed orally, so it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants.[1] Limited information indicates that maternal doses of deferoxamine up to 2 grams daily do not affect iron levels in breastmilk and did not cause any adverse effects in two breastfed infants.[2] Some experts advocate breastfeeding in women receiving deferoxamine for iron overload caused by beta-thalassemia.[3] However, since little published information is available on the use of deferoxamine during breastfeeding, monitoring of the infant's serum iron is recommended.

### Drug Levels

Maternal Levels. A woman with beta-thalassemia restarted deferoxamine 2 grams subcutaneously daily for 5 days per week 3 days after delivery. Milk was collected on days 5 and 9 postpartum and 11 weeks postpartum. Iron levels in milk were 0.7, 10.4 and 4.8 micromoles/L, respectively (normal range 7.7 to 22.4 micromoles/L).[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with beta-thalassemia restarted deferoxamine 2 grams subcutaneously 5 days per week 3 days after delivery. She breastfed (extent not stated) one of her twins from birth. After 17 days of breastfeeding, the infant's serum levels were as follows: iron 17.4 micromoles/L, ferritin 200 mcg/L, and transferrin16.8 micromoles/L, all in the normal range. Serum urea, calcium and magnesium were also normal. The second twin was hospitalized for longer and breastfeeding status in the hospital was not reported. Both infants were breastfed (extent not stated) for 4 months postpartum. Both had normal neurologic and motor development at 4 months and laboratory values consistent with their heterozygous beta-thalassemia: hemoglobin F 11.1% and 8.4%, hemoglobin 10.5 g/L and 10.5 g/L, reticulocytes 3.3% and 2.6%, and median erythrocyte volume 60 fL and 58 fL. Their serum levels of iron, ferritin, transferrin, liver enzymes, plasma urea and bilirubin were all normal.[2]

A woman with beta-thalassemia gave birth to an infant by cesarean section and breastfed her infant (extent not stated) from birth while receiving deferoxamine (dosage not stated). No adverse effects were reported in her infant.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Deferasirox

### References

1 Jensen CE, Tuck SM, Wonke B. (1995). Fertility in beta thalassaemia major: a report of 16 pregnancies, preconceptual evaluation and a review of the literature. Br J Obstet Gynaecol.
2 Surbek DV, Glanzmann R, Nars PW, et al. (1998). Pregnancy and lactation in homozygous beta-thalassemia major. J Perinat Med.
3 Pafumi C, Zizza G, Caruso S, et al. (2000). Pregnancy outcome of a transfusion-dependent thalassemic woman. Ann Hematol.

## Substance Identification

### Substance Name

Deferoxamine

### CAS Registry Number

70-51-9

### Drug Class

Breast Feeding

Lactation

Chelating Agents

Iron Chelating Agents